# Nicotine

CASRN: 54-11-5

## Drug Levels and Effects

### Summary of Use during Lactation

Smoking tobacco reduces milk yield and often results in early cessation of breastfeeding. Stopping smoking during pregnancy may increase the likelihood of initiating breastfeeding postpartum.[1] Maternal smoking is also a major risk factor for sudden infant death syndrome.. Some authors and guidelines have advocated use of nicotine replacement products in smoking mothers to reduce the risk to breastfed infants of inhaled smoke and toxins in maternal cigarette smoke.[2-4] However, others point out that based on animal data, nicotine may increase the risk of sudden infant death syndrome and might interfere with normal infant lung development. These authors recommend against using any form of nicotine in nursing mothers.[5,6] No studies have been performed to resolve these issues, but one report indicates that a neonate exposed to nicotine during pregnancy had withdrawal symptoms that were relieves somewhat by maternal breastmilk.[7] Only nicotine patches have been formally studied in nursing mothers, but a mother with high doses of oral nicotine pouches developed hyperprolactinemia of about 25 times normal.

The Academy of Breastfeeding Medicine considers nicotine replacement products to be compatible with breastfeeding, with the type of product determined by the clinical needs of the breastfeeding mother.[4] An alternate smoking cessation product may be preferred during nursing.

### Drug Levels

Maternal Levels. Fifteen lactating women who smoked an average of 17 (range 14 to 20) cigarettes daily were studied during smoking and after smoking cessation while using nicotine transdermal patches in decreasing doses of 21, 14 and 7 mg daily. One woman who smoked 6 cigarettes daily was started on the 14 mg daily patch. The women supplied milk samples from before and after each nursing on the day before attending their clinic appointments which were 2 to 3 weeks apart. Milk was analyzed for nicotine and its metabolite cotinine. During smoking, the milk nicotine concentration was about 200 mcg/L. Steady-state milk nicotine concentrations during the 21 mg patch was about 175 mcg/L, which was not statistically different from smoking levels. Likewise, milk cotinine levels were not different between smoking and the 21 mg patch. Milk nicotine concentrations were lower than smoking levels with the 14 and 7 mg patches at about 140 and 70 mcg/L, respectively. Cotinine milk levels were also lower with these doses than with smoking. Calculated daily infant nicotine equivalent dosages (nicotine plus cotinine) were as follows: 25.2 mcg/kg with smoking, 23 mcg/kg with the 21 mg patch, 15.8 mcg/kg with the 14 mg patch, and 7.5 mcg/kg with the 7 mg patch. On average, infants ingest 1.9% of the maternal weight-adjusted dosage of nicotine and about 7.8% of the maternal weight-adjusted dosage when cotinine was also considered.[2]

A paper reporting a new method of analyzing nicotine found that nonsmokers (n = 2) had milk nicotine concentrations averaging 0.049 mcg/L of nicotine, passive smokers (n = 5) had an average concentration of 0.18 mcg/L and smokers (n = 5) had an average concentration of 1.59 mcg/L.[8]

Infant Levels. Nine breastfed infants with an average age of 4.8 months (range 2.5 to 21 months) whose mothers were using nicotine patches for smoking cessation had plasma concentrations of cotinine measured during maternal use of a 21 mg nicotine patch. Infant plasma cotinine averaged 22 mcg/L (range 19 to 25 mcg/L), which averaged 13.4% of the simultaneous maternal cotinine plasma concentrations.[2]

An infant was born to a mother who was vaping nicotine and postpartum while partially breastfeeding the infant. On approximately day 18 of life, cotinine was detected in the neonate’s urine at 83 mcg/L, (reference range <5 mcg/l) and urine nicotine was <5 mcg/L. The mother stopped vaping so she could breastfeed her infant and on day 27, the infant’s urinary cotinine level had dropped to less than 5 mcg/L.[7]

### Effects in Breastfed Infants

Maternal smoking is a major risk factor for sudden infant death syndrome (SIDS). Nicotine is thought to be the causative factor by reducing the dopamine content of the carotid bodies and reducing the infant's ability to autoresuscitate during hypoxic episodes.[5]

Nicotine in the breastmilk of smokers also appears to reduce the heart rate variability in male breastfed infants.[9]

In a study of the infants of 5 mothers who were using 21 mg nicotine patches for smoking cessation, the infants' average Denver Developmental age was equivalent to their chronological age.[2]

An infant was born to a mother who was vaping nicotine throughout pregnancy and postpartum partially provided breastmilk to her infant because of a limited breastmilk supply. Her infant was initially admitted to the newborn nursery and transferred to the NICU after 4 hours due to signs and symptoms of respiratory distress, grunting and tachypnea, and required high-flow nasal canula oxygen therapy at 2 L/minute with FiO2 of 25%. Laboratory values and imaging were consistent with transient tachypnea of the newborn. On the second day of life, the newborn’s examination was notable for irritability, tremors, hypertonia, weak suck, high-pitched cry, and sneezing. The neonate’s Finnegan scores remained persistently elevated over the first 24 hours with the highest score of 18. Morphine was administered throughout most of the newborn’s NICU stay, with the highest dose of 0.1 mg/kg/dose every 3 h. Morphine was gradually weaned beginning on day 8 of life; however, by day 17, the infant’s Finnegan scores had begun to trend upward and the infant’s clinical assessment was notable for a high-pitched cry, irritability, difficulty sleeping after feeds, and excessive sucking. Consequently, the morphine dose was increased. It was noted that symptoms were more pronounced when breastmilk intake was minimal, leading to speculation of postnatal exposure through breastmilk. The mother admitted to using e-cigarettes, taking several puffs throughout the day. The infant had elevated cotinine levels in urine. The mother stopped vaping in order to breastfeed and by day 33, morphine was discontinued and the infant was discharged home the next day.[7]

### Effects on Lactation and Breastmilk

Cigarette smoking reduces milk yield.[10,11] This effect may be caused by nicotine, although other factors associated with smoking may also play a role.[12-14]

In a study of 15 nursing mothers who were using nicotine patches in decreasing doses from 21 mg to 14 mg to 7 mg over several weeks, their average milk production was 17% lower than average literature values as judged by infant milk intake. The study did not directly compare the milk production of smokers to nonsmokers, however. In this study, infant milk intake during maternal use of the nicotine patch was similar to that during smoking.[2]

A woman had a history of mild galactorrhea and breast engorgement from risperidone that had improved with the discontinuation of risperidone 1 year prior. She had serum prolactin levels measured. She had quit smoking 2 to 3 weeks prior to having her prolactin levels checked and had started using 10 to 12 nicotine pouches daily (6 mg each) to help with nicotine cravings. Initial laboratory values showed a prolactin level of 312 mcg/L (reference 5.2 to 26.5 mcg/L). Because she was trying to get pregnant, she discontinued nicotine pouches immediately after learning of high prolactin levels. Prolactin levels normalized 2 and 3 days later (13.4 mcg/L and 8.8 mcg/L, respectively).[15]

### Alternate Drugs to Consider

(Smoking Cessation) Bupropion

### References

1 Sakowicz A, Buzzett JC, Segovia-Molina R, et al. The association between timing of tobacco smoking cessation and breastfeeding initiation. Am J Obstet Gynecol MFM 2026:101983.42082053
2 Ilett KF, Hale TW, Page-Sharp M, et al. Use of nicotine patches in breast-feeding mothers: Transfer of nicotine and cotinine into human milk. Clin Pharmacol Ther 2003;74:516–24.14663454
3 Le Lous M, Torchin H. Smoking and Breastfeeding - CNGOF-SFT Expert Report and Guidelines on the management for Smoking Management During Pregnancy. Gynecol Obstet Fertil Senol 2020;48:612–8.32247096
4 Harris M, Schiff DM, Saia K, et al. Academy of Breastfeeding Medicine Clinical Protocol #21: Breastfeeding in the setting of substance use and substance use disorder (Revised 2023). Breastfeed Med 2023;18:715–33.37856658
5 Alm B, Lagercrantz H, Wennergren G. Stop SIDS--sleeping solitary supine, sucking soother, stopping smoking substitutes. Acta Paediatr 2006;95:260–2.16497633
6 Maritz GS. Nicotine replacement therapy during pregnancy and lactation induce structural and functional changes in the lungs of the progeny. Curr Women's Health Rev 2012;8:256–68. doi:10.2174/157340412803760702
7 Bolumen-Lopez A, U'Wais A, Patel K, et al. Neonatal nicotine withdrawal in a newborn exposed to maternal e-cigarette use. J Neonatal Perinatal Med 2026;19:445–8.41067746
8 Paola Antonella AG, Germán Ernesto G, Liliana F, et al. Luminescent metal-organic framework (MOF) sensors for sensitive determination of nicotine in breast milk. Anal Methods 2025;18:361–71.41400136
9 Dahlström A, Ebersjo C, Lundell B. Nicotine in breast milk influences heart rate variability in the infant. Acta Paediatr 2008;97:1075–9.18498428
10 Vio F, Salazar G, Infante C. Smoking during pregnancy and lactation and its effects on breast-milk volume. Am J Clin Nutr 1991;54:1011–6.1957815
11 Hopkinson JM, Schanler RJ, Fraley JK, et al. Milk production by mothers of premature infants: Influence of cigarette smoking. Pediatrics 1992;90:934–8.1437437
12 Andersen AN, Lund-Andersen C, Larsen JF, et al. Suppressed prolactin but normal neurophysin levels in cigarette smoking breast-feeding women. Clin Endocrinol (Oxf) 1982;17:363–8.7139967
13 Amir LH, Donath SM. Does maternal smoking have a negative physiological effect on breastfeeding? The epidemiological evidence. Birth 2002;29:112–23.12000412
14 Amir LH, Donath SM. Does maternal smoking have a negative physiological effect on breastfeeding? The epidemiological evidence. Breastfeed Rev 2003;11:19–29.14768313
15 Belcher V, Haider A, Crowder K, et al. An unusual suspect: Hyperprolactinemia from nicotine pouches. AACE Endocrinol Diabetes 2025;12:246–8.41467124

## Substance Identification

### Substance Name

Nicotine

### CAS Registry Number

54-11-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ganglionic Stimulants

Nicotinic Agonists